# Sumatriptan

CASRN: 103628-46-2

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of sumatriptan in breastmilk, amounts ingested by the infant are small. It also has poor oral bioavailability, further decreasing infant exposure to the drug. Some authors have suggested that withholding breastfeeding for 8 hours after a single subcutaneous injection would virtually eliminate infant exposure to the drug.[1] The manufacturer recommends withholding breastfeeding for 12 hours after a dose. Withholding breastfeeding might be helpful in extreme cases, such as in the mother of a preterm infant, but sumatriptan would not be expected to cause any adverse effects in most breastfed infants and has been recommended as a triptan of choice in breastfeeding.[1] Painful, burning nipples and breast pain have been reported after doses of sumatriptan and other triptans. This has occasionally been accompanied by a decrease in milk production.

### Drug Levels

Maternal Levels. Five women who had been breastfeeding for 11 to 28 weeks received a single dose of sumatriptan 6 mg by subcutaneous injection. The peak milk level averaged 87.2 mcg/L (range 62 to 113 mcg/L), and it occurred 2.5 hours (range 1.7 to 3.5 hours) after the dose. The mean half-life in milk was 2.2 hours (range 1.2 to 3.1 hours). The authors calculated that an exclusively breastfed infant would receive 14.4 mcg in breastmilk with this dose, which is 3.5% of the weight-adjusted dosage.[2]

Seven women who were at least 1 month postpartum and used sumatriptan to treat migraine provided one milk sample before the dose, then additional milk samples at 1, 2, 4, 8, 12 and 24 hours after the dose. One mother took a 6 mg dose subcutaneously, two took 20 mg by nasal spray, four took a 50 mg oral dose (including one who used the nasal spray separately), and one mother took 100 mg orally. Peak milk levels did not correlate well with dosage, averaging 59.3 mcg/L (range 24.6 to 112.8 mcg/L) and occurred 2 to 4 hours after the dose. The average milk level was 23.2 mcg/L (range 7.7 to 50.6 mcg/L) and the half-life in milk averaged 4.9 hours (range 3.6 to 5.9 hours). The average infant’s daily dosage of sumatriptan was 3.5 mcg/kg (range 1.2 to 7.6 mcg/kg) and the weight-adjusted infant dosage averaged 0.7% (range 0.2 to 1.8%) of the maternal dose. [3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One author reported correspondence with the drug's manufacturer stating that of 3 women known to the manufacturer who used sumatriptan (dose and route unspecified) during breastfeeding none reported adverse effects on the infants.[4]

### Effects on Lactation and Breastmilk

One author reported correspondence with the drug's manufacturer stating that 1 woman who used a single injection of sumatriptan (dose unspecified) during breastfeeding had a cessation of lactation.[4]

A review of four European adverse reaction databases found 26 reported cases of painful, burning nipples, painful breasts, breast engorgement and/or painful milk ejection in women who took a triptan while nursing. Pain was sometimes intense and occasionally led to decreased milk production. Pain generally subsided with time as the drug was eliminated. The authors proposed that triptans may cause vasoconstriction of the arteries in the breast, nipples, and the arteries surrounding the alveoli and milk ducts, causing a painful sensation and a painful milk ejection reﬂex.[5]

### Alternate Drugs to Consider

Eletriptan, Rizatriptan, Zolmitriptan

### References

1 Ornello R, Maassen van den Brink A, Puledda F, et al. Migraine management during pregnancy, breastfeeding and in women planning pregnancy. Cephalalgia 2025;45:3331024251393945.41263702
2 Wojnar-Horton RE, Hackett LP, Yapp P, et al. Distribution and excretion of sumatriptan in human milk. Br J Clin Pharmacol 1996;41:217–21.8866921
3 Amundsen S, Nordeng H, Fuskevåg OM, et al. Transfer of triptans into human breast milk and estimation of infant drug exposure through breastfeeding. Basic Clin Pharmacol Toxicol 2021;128:795–804.33730376
4 Kristensen J. Sumatriptan and breastfeeding. Aust J Hosp Pharm 1996;26:460.
5 Conijn M, Maas V, van Tuyl M, et al. Breastfeeding-related adverse drug reactions of triptans: A descriptive analysis using four pharmacovigilance databases. Breastfeed Med 2024;19:645–51.38563407

## Substance Identification

### Substance Name

Sumatriptan

### CAS Registry Number

103628-46-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Serotonin Receptor Agonists

Serotonin 5-HT1 Receptor Agonists

Triptans

Vasoconstrictor Agents